# Etodolac

CASRN: 41340-25-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of etodolac during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

## Substance Identification

### Substance Name

Etodolac

### CAS Registry Number

41340-25-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal